# Somapacitan

CASRN: 1338578-34-9

## Drug Levels and Effects

### Summary of Use during Lactation

Because somapacitan is a large molecule that is poorly absorbed orally, it is not likely to reach the bloodstream of the infant or cause any adverse effects in breastfed infants. However, there is no published experience with somapacitan during breastfeeding, so an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date. However, the closely related recombinant human growth hormone, somatropin, has been reported to increase milk production.

### Alternate Drugs to Consider

Somatropin

## Substance Identification

### Substance Name

Somapacitan

### CAS Registry Number

1338578-34-9

### Drug Class

Breast Feeding

Lactation

Human Growth Hormone